# Astragalus

## Drug Levels and Effects

### Summary of Use during Lactation

Astragalus (Astragalus membranaceus) root contains numerous saponins and isoflavones. Astragalus is a purported galactogogue;[1] however, no scientifically valid clinical trials support this use, except in a study in which Astragalus was only one component of a mixture of herbs. Galactogogues should never replace evaluation and counseling on modifiable factors that affect milk production.[2,3] No data exist on the excretion of any components of Astragalus into breastmilk or on the safety and efficacy of Astragalus in nursing mothers or infants. Astragalus is generally well tolerated, with mild gastrointestinal irritation and allergic reactions reported.

Dietary supplements do not require extensive pre-marketing approval from the U.S. Food and Drug Administration. Manufacturers are responsible to ensure the safety, but do not need to prove the safety and effectiveness of dietary supplements before they are marketed. Dietary supplements may contain multiple ingredients, and differences are often found between labeled and actual ingredients or their amounts. A manufacturer may contract with an independent organization to verify the quality of a product or its ingredients, but that does not certify the safety or effectiveness of a product. Because of the above issues, clinical testing results on one product may not be applicable to other products. More detailed information about dietary supplements is available elsewhere on the LactMed Web site.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

A randomized controlled study evaluated the efficacy of an herbal galactagogic decoction combined with auricular acupressure in improving lactation outcomes. The decoction was self-formulated consisting of Wang Bu Liu Xing (Vaccaria seeds) 10 grams, Glycyrrhiza glabra (licorice) 6 grams, Astragalus membranaceus 12 grams, Angelica sinensis (dong quai) 12 grams, Atractylodes macrocephala 10 grams, Tongzhi 30 grams, Codonopsis pilosula (dangshen) 12 grams, and Andrographis paniculata (green chiretta) 6 grams. One daily dose was decocted in water to yield approximately 200 mL of liquid, which was divided into 2 oral doses per day. Both groups were treated for 2 weeks. A total of 104 women with postpartum hypogalactia were randomly assigned to a control group (auricular acupressure alone, n = 52) or an intervention group (auricular acupressure plus herbal decoction, n = 52) for 2 weeks. Primary outcomes included milk production and formula supplementation, while secondary outcomes were serum hormone levels (estradiol, progesterone, and prolactin), symptom scores, psychological status, and clinical effectiveness. Compared with the control group, the intervention group demonstrated lower estradiol and progesterone levels, higher prolactin levels, increased milk production, and reduced formula supplementation.[4]

### References

1 Scott CR, Jacobson H. A selection of international nutritional and herbal remedies for breastfeeding concerns. Midwifery Today Int Midwife 2005;75:38–9.16320878
2 Brodribb W. ABM Clinical Protocol #9: Use of galactogogues in initiating or augmenting maternal milk production, second revision 2018. Breastfeed Med 2018;13:307–14.29902083
3 Breastfeeding challenges: ACOG Committee Opinion, Number 820. Obstet Gynecol 2021;137:e42–e53.33481531
4 Li K, Cai D, Gao Z, et al. Effect of a herbal galactagogic formula combined with auricular acupressure on breast milk production and hormonal profiles in women with postpartum hypogalactia: A randomized controlled study. Afr J Reprod Health 2026;30:46–54.42138144

## Substance Identification

### Substance Name

Astragalus

### Scientific Name

Astragalus membranaceus

### Drug Class

Breast Feeding

Lactation

Milk, Human

Complementary Therapies

Galactogogues

Phytotherapy

Plants, Medicinal